# Mesna

CASRN: 19767-45-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of mesna during breastfeeding. Because it is used with toxic drugs such as ifosfamide, the manufacturer recommends to not breastfeed during treatment and for 1 week after the last dose of mesna or ifosfamide.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Mesna

### CAS Registry Number

19767-45-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Protective Agents